# Eslicarbazepine

CASRN: 104746-04-5

## Drug Levels and Effects

### Summary of Use during Lactation

One mother breastfed two infants while taking eslicarbazepine with no adverse effects. Additionally, eslicarbazepine is the active metabolite of oxcarbazepine. Limited information indicates that oxcarbazepine or eslicarbazepine would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. Monitor the infant for drowsiness, adequate weight gain, and developmental milestones, especially in younger, exclusively breastfed infants and when using combinations of anticonvulsants.

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Eslicarbazepine is the active 10-hydroxy metabolite of oxcarbazepine.

Maternal Levels. Two women were treated with oxcarbazepine during pregnancy and lactation. Milk levels of eslicarbazepine metabolite in breastmilk were 50 to 65% of the maternal blood level in one mother during the first week postpartum. Specific values were not provided in the abstract.[1]

An epileptic woman took oxcarbazepine orally 300 mg 3 times daily during pregnancy and postpartum. Milk levels of eslicarbazepine taken in the 6 months postpartum were about 50% of maternal blood levels which averaged 5.7 mg/L. Therefore, milk levels averaged 2.85 mg/L for eslicarbazepine, although the authors reported that the assay method was not very accurate for breastmilk.[2]

A woman diagnosed with bipolar disorder was taking oxcarbazepine 300 mg every 12 hours (9 mg/kg) by mouth. Milk and blood samples were taken in the morning 11 hours after the previous dose twice at 8 and 23 days postpartum. Levels of eslicarbazepine were 5.6 and 10.4 mg/L on the 2 days, respectively.[3]

Infant Levels. A woman diagnosed with bipolar disorder was taking oxcarbazepine 300 mg every 12 hours (9 mg/kg) by mouth. Blood samples were obtained from her breastfed infant (extent not stated) after breastfeeding (exact time not stated) on 2 occasions, at 8 and 23 days of age. The infant had serum concentrations of eslicarbazepine of <0.1 and 0.2 mg/L at the 2 times, respectively.[3]

Two infants whose mothers were taking oxcarbazepine during pregnancy and postpartum breastfeeding (extent not stated) had blood samples at 3 to 4 weeks of age. Their serum eslicarbazepine concentrations were about 5% of their mothers' serum concentrations.[4]

An infant was born to a mother who was taking oxcarbazepine 150 mg twice daily during pregnancy and postpartum. The infant's serum eslicarbazepine concentration on postnatal day 6 was 2.6 mg/L, which was about 15% that of the mother's.[5]

A mother was taking eslicarbazepine for seizure disorder. She was taking eslicarbazepine 2000 mg daily in two divided doses, 800 mg in the morning and 1400 mg in the evening, during pregnancy and immediately postpartum. At 14 days of age, her exclusively breastfed infant had a serum concentration of 1.8 mg/L at 8 hours after the mother’s previous dose, which was 9.13% of the maternal serum concentration. With her second baby, she was taking eslicarbazepine 1600 mg daily in two divided doses. At 18 days of age, her exclusively breastfed infant had a serum concentration of 1.5 mg/L at 10 hours after the mother’s previous dose.[6]

### Effects in Breastfed Infants

A mother exclusively breastfed two successive infants for 4 months and partially breastfed them for 13 months while taking eslicarbazepine. No adverse events were reported in either infant and the infants had normal developmental milestones and normal growth and 5 and 2.5 years of age, respectively.[6]

See also the LactMed record on oxcarbazepine for relevant information.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Pedersen B. Oxcarbazepine in breast milk. 17^th^ Epilepsy International Congress, Jerusalem Israel. 1987
2 Bülau P, Paar WD, von Unruh GE. Pharmacokinetics of oxcarbazepine and 10-hydroxy-carbazepine in the newborn child of an oxcarbazepine-treated mother. Eur J Clin Pharmacol 1988;34:311–3.3396622
3 Lutz UC, Wiatr G, Gaertner HJ, et al. Oxcarbazepine treatment during breast-feeding: A case report. J Clin Psychopharmacol 2007;27:730–2.18004156
4 Öhman I, Tomson T. Pharmacokinetics of oxcarbazine in neonatal period and during lactation. Epilepsia 2009;50 (Suppl. S4):239. doi:10.1111/j.1528-1167.2009.02063.x
5 Chen CY, Li X, Ma LY, et al. In utero oxcarbazepine exposure and neonatal abstinence syndrome: Case report and brief review of the literature. Pharmacotherapy 2017;37:e71–e5.28543284
6 Reversat-Brulant T, Moschetti S, Atzenhoffer M, et al. Eslicarbazepine use during breastfeeding: A case report. J Hum Lact 2026;42:479–84.41885510

## Substance Identification

### Substance Name

Eslicarbazepine

### CAS Registry Number

104746-04-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants